# Moxetumomab Pasudotox

CASRN: 1020748-57-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of moxetumomab pasudotox during breastfeeding. Because moxetumomab is a large protein molecule with a molecular weight of about 63,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Pasudotox is a 38 KDa fragment of Pseudomonas exotoxin-A (PE38) with potential anti-cancer activity that may enter milk. Until more data become available, moxetumomab pasudotox should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Moxetumomab Pasudotox

### CAS Registry Number

1020748-57-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents